# Centruroides (Scorpion) Immune F(ab)2

CASRN: 885263-20-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of Centruroides (scorpion) immune F(ab)2 (equine) during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Centruroides (Scorpion) Immune F(ab)2

### CAS Registry Number

885263-20-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Antivenins

Immunoglobulin Fragments